# Oxymetazoline

CASRN: 1491-59-4

## Drug Levels and Effects

### Summary of Use during Lactation

Although no information exists on the use of oxymetazoline specifically during breastfeeding, very little should reach the infant through breastmilk because of the local administration and limited absorption into the maternal bloodstream. It is recommended over oral systemic decongestants such as pseudoephedrine during breastfeeding.[1] Topical use on the face is unlikely to present a risk to the nursing infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Anderson PO. Decongestants and milk production. J Hum Lact 2000;16:294.11155604

## Substance Identification

### Substance Name

Oxymetazoline

### CAS Registry Number

1491-59-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic alpha-Agonists

Sympathomimetics

Nasal Decongestants